# Leucovorin

CASRN: 58-05-9

## Drug Levels and Effects

### Summary of Use during Lactation

Leucovorin (citrovorum factor; folinic acid) and its levo- isomer, levoleucovorin, are folic acid derivatives that are normal components of breastmilk.[1,2] Because leucovorin and levoleucovorin are used as therapeutic agents with potentially toxic drugs such as fluorouracil or methotrexate, the LactMed record of the drug it is used with should be consulted.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Page R, Robichaud A, Arbuckle TE, et al. Total folate and unmetabolized folic acid in the breast milk of a cross-section of Canadian women. Am J Clin Nutr 2017;105:1101–9.28298392
2 Su Y, Mao Y, Tian F, et al. Profile of folate in breast milk from Chinese women over 1-400 days postpartum. Nutrients 2022;14:2962.35889919

## Substance Identification

### Substance Name

Leucovorin

### CAS Registry Number

58-05-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidotes

Vitamin B Complex

Vitamins